# Dipyridamole

CASRN: 58-32-8

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of dipyridamole during breastfeeding, although labeling states that the drug is excreted into human milk. Until more data become available, dipyridamole should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. If it is used by a nursing mother, monitor the infant for bruising and bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin

## Substance Identification

### Substance Name

Dipyridamole

### CAS Registry Number

58-32-8

### Drug Class

Breastfeeding

Lactation

Milk, Human

Phosphodiesterase Inhibitors

Vasodilator Agents

Platelet Aggregation Inhibitors